# Vitamin C

CASRN: 50-81-7

## Drug Levels and Effects

### Summary of Use during Lactation

Vitamin C is a normal component of human milk and is a key milk antioxidant. The recommended vitamin C intake in lactating women is 120 mg daily, and for infants aged 6 months or less is 40 mg daily.[1] High daily doses up to 1000 mg increase milk levels, but not enough to cause a health concern for the breastfed infant and is not a reason to discontinue breastfeeding. Nursing mothers may need to supplement their diet to achieve the recommended intake or to correct a known deficiency. Maternal doses of vitamin C in prenatal vitamins at or near the recommended intake do not alter milk levels.

Freezing (-20 degrees C) freshly expressed mature milk from hospitalized mothers of term and preterm infants does not change milk vitamin C levels for at least 3 months of freezer storage.[2] After 6 to 12 months of freezing (-20 degrees C), vitamin C levels can decrease by 15 to 30%. Storage at -80 degrees C preserves vitamin C levels for up to 8 months, with 15% loss by 12 months.[3]

### Drug Levels

Maternal Levels Average mature milk vitamin C concentrations are 50 to 90 mg/L in mothers consuming adequate vitamin C in their diet.[4-8] Milk concentrations are not markedly increased with routine daily multivitamin supplementation.[6,8-10] Vitamin C levels are higher in colostrum by 10 to 20 mg/L compared with mature milk.[11,12] Levels are relatively stable until after 12 months postpartum when they begin to decrease slightly and reach 30% of previous levels by 18 to 24 months postpartum.[4]

Milk levels correlate with blood levels, and both are influenced by maternal diet, particularly in poorly nourished mothers whose milk levels respond more robustly to increases in dietary vitamin C intake.[13,14] Mothers who smoke have lower milk vitamin C levels than those who do not, which is consistent with the known negative effect of smoking on human blood vitamin C levels.[15,16]

Milk from poorly nourished mothers with inadequate vitamin C intake has vitamin C levels of 30 to 50 mg/L during the first postpartum week, and 20 to 30 mg/L in mature milk.[15-17] Supplementation of deficient mothers with doses of 100 to 200 mg daily increases the mature milk level slightly to 40 to 60 mg/L.[18,19]

Among mothers living in rural The Gambia, West Africa, blood and milk vitamin C levels increased during seasonal periods of increased dietary intake from vitamin C-rich fruit. Milk levels were 50 to 60 mg/L during April to June when mango availability and consumption was highest, and 40 to 50 mg/L during December to February when orange availability and consumption was highest. Milk levels were 20 to 30 mg/L at other times of the year when consumption of these fruits was lowest. Mothers were concurrently taking a dietary supplement providing 35 mg daily of vitamin C throughout the year.[13]

Pooled and pasteurized donor milk from milk banks in Ontario and British Colombia, Canada had average vitamin C levels of only 17.7 mg/L (range 1.9 to 43.2 mg/L) and 21.7 mg/L (range 0 to 68 mg/L), respectively.[17,20]

Fifteen well-nourished nursing mothers between 7 and 20 weeks postpartum were given 250, 500, or 1,000 mg vitamin C once daily for two days. Average milk levels were between 100 and 120 mg/L and did not significantly differ between the groups. The maximum level reported was 158 mg/L.[11] Using this maximum level, an exclusively breastfeeding infant would be expected to consume about 25 mg/kg daily, which is similar to the treatment dose for infants with scurvy, and well below infant exposures known to cause harm.[21]

A case report from the U.S. of a well-nourished mother taking vitamin C 4,000 mg per day throughout pregnancy and lactation had a milk level of 105 mg/L on day 38 postpartum.[22]

Fifteen mothers who delivered preterm infants between 27 and 35 weeks gestation had average mature milk vitamin C levels of 120 to 130 mg/L compared to 95 to 120 mg/L in 12 term mothers. Both the term and preterm mothers had adequate dietary vitamin C intake plus were taking dietary supplements containing 60 to 270 mg daily of vitamin C. This study suggests that preterm infants fed their mother's milk are not at greater risk of vitamin C deficiency than term infants.[23] These investigators measured both ascorbic acid and dehydroascorbic acid in milk samples which may have accounted for their higher reported levels compared to other studies.

Maternal administration of a 500 mg vitamin C plus 100 IU of vitamin E daily for 30 days increased biochemical markers of milk antioxidant activity in healthy lactating women between 1 and 6 months postpartum compared to no supplementation.[24]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Sixty healthy lactating women between 1 and 6 months postpartum exclusively breastfeeding their infants were given vitamin C 500 mg plus vitamin E 100 IU once daily for 30 days, or no supplementation. Infants of supplemented mothers had increased biochemical markers of antioxidant activity in their urine. Clinical outcomes were not reported.[24]

Eighteen preterm infants, seven of whom were less than 32 weeks gestational age, who were fed pooled, Holder-pasteurized donor milk beginning during the first three days of life had their average blood plasma ascorbic acid concentrations decrease from 15.5 mg/L at birth to 5.4 mg/L by 1 week of age, and to 4.1 mg/L by 3 weeks of age. The authors described the 1- and 3-week levels as subtherapeutic (<6 mg/L) and indicative of inadequate intake, potentially jeopardizing postnatal growth potential.[25] Although this study was conducted before advances in the provision of parenteral nutrition and enteral milk fortification for preterm infants, contemporary studies suggest that inadequate vitamin C intake from pooled, pasteurized donor milk may be a potential health problem for preterm infants receiving donor milk.[17]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 National Institutes of Health Office of Dietary Supplements. Vitamin C fact sheet for health professionals. 2018. https://ods.od.nih.gov/factsheets/VitaminC-HealthProfessional/
2 Bank MR, Kirksey A, West K, et al. Effect of storage time and temperature on folacin and vitamin C levels in term and preterm human milk. Am J Clin Nutr 1985;41:235-42.3969932
3 Romeu-Nadal M, Castellote AI, López-Sabater MC. Effect of cold storage on vitamins C and E and fatty acids in human milk. Food Chem 2008;106:65-70. doi:10.1016/j.foodchem.2007.05.046
4 Karra MV, Udipi SA, Kirksey A, et al. Changes in specific nutrients in breast milk during extended lactation. Am J Clin Nutr 1986;43:495-503.3962902
5 Hoppu U, Rinne M, Salo-Vaananen P, et al. Vitamin C in breast milk may reduce the risk of atopy in the infant. Eur J Clin Nutr 2005;59:123-8.15340369
6 Martysiak-Żurowska D, Zagierski M, Wos-Wasilewska E, et al. Higher absorption of vitamin C from food than from supplements by breastfeeding mothers at early stages of lactation. Int J Vitam Nutr Res 2016;86:81-7.29219785
7 Byerley LO, Kirksey A. Effects of different levels of vitamin C intake on the vitamin C concentration in human milk and the vitamin C intakes of breast-fed infants. Am J Clin Nutr 1985;41:665-71.3984919
8 Sneed SM, Zane C, Thomas MR. The effects of ascorbic acid, vitamin B_6_, vitamin B_12_, and folic acid supplementation on the breast milk and maternal nutritional status of low socioeconomic lactating women. Am J Clin Nutr 1981;34:1338-46.7258124
9 Thomas MR, Kawamoto J, Sneed SM, et al. The effects of vitamin C, vitamin B_6_, and vitamin B_12_ supplementation on the breast milk and maternal status of well-nourished women. Am J Clin Nutr 1979;32:1679-85.463805
10 Thomas MR, Sneed SM, Wei C, et al. The effects of vitamin C, vitamin B_6_, vitamin B_12_, folic acid, riboflavin, and thiamin on the breast milk and maternal status of well-nourished women at 6 months postpartum. Am J Clin Nutr 1980;33:2151-6.7424809
11 Rajalakshmi R, Deodhar AD, Ramakrishnan CV. Vitamin C secretion during lactation. Acta Paediatr Scand 1965;54:375-82.14343448
12 Ahmed L, Jr, Islam S, Khan N, et al. Vitamin C content in human milk (colostrum, transitional and mature) and serum of a sample of Bangladeshi mothers. Malays J Nutr 2004;10:1-4.22691742
13 Bates CJ, Prentice AM, Prentice A, et al. Seasonal variations in ascorbic acid status and breast milk ascorbic acid levels in rural Gambian women in relation to dietary intake. Trans R Soc Trop Med Hyg 1982;76:341-7.7112656
14 Daneel-Otterbech S, Davidsson L, Hurrell R. Ascorbic acid supplementation and regular consumption of fresh orange juice increase the ascorbic acid content of human milk: studies in European and African lactating women. Am J Clin Nutr 2005;81:1088-93.15883433
15 Dror DK, Allen LH. Overview of nutrients in human milk. Adv Nutr 2018;9 (Suppl 1):278S-294S.29846526
16 Schleicher RL, Carroll MD, Ford ES, et al. Serum vitamin C and the prevalence of vitamin C deficiency in the United States: 2003-2004 National Health and Nutrition Examination Survey (NHANES). Am J Clin Nutr 2009;90:1252-63.19675106
17 Castro M, Pitino M, Bando N, et al. Infants exclusively fed human donor milk require supplementation with vitamin C. E-PAS 2019;3845:396. https://www.xcdsystem.com/pas/program/2019/index.cfm
18 Deodhar AD, Hajalakshmi R, Ramakrishnan CV. Studies on human lactation. III. Effect of dietary vitamin supplementation on vitamin contents of breast milk. Acta Paediatr 1964;53:42-8.14114316
19 Bates CJ, Prentice AM, Prentice A, et al. The effect of vitamin C supplementation on lactating women in Keneba, a West African rural community. Int J Vitam Nutr Res 1983;53:68-76.6853060
20 Elisia I, Kitts DD. Quantification of hexanal as an index of lipid oxidation in human milk and association with antioxidant components. J Clin Biochem Nutr 2011;49:147-52.22128211
21 Genetic and Rare Diseases Information Center Gaithersburg (MD) National Center for Advancing Translational Sciences (US). Scurvy. 2016. https://rarediseases.info.nih.gov/diseases/10406/scurvy
22 Anderson DM, Pittard WB, III. Vitamin E and C concentrations in human milk with maternal megadosing: A case report. J Am Diet Assoc 1985;85:715-7.3998344
23 Udipi SA, Kirksey A, West K, et al. Vitamin B_6_, vitamin C and folacin levels in milk from mothers of term and preterm infants during the neonatal period. Am J Clin Nutr 1985;42:522-30.4041128
24 Zarban A, Toroghi MM, Asli M, et al. Effect of vitamin C and E supplementation on total antioxidant content of human breastmilk and infant urine. Breastfeed Med 2015;10:214-7.25915716
25 Heinonen K, Mononen I, Mononen T, et al. Plasma vitamin C levels are low in premature infants fed human milk. Am J Clin Nutr 1986;43:923-4.3717067

## Substance Identification

### Substance Name

Vitamin C

### CAS Registry Number

50-81-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vitamins